# Marine Oils

CASRN: 8016-13-5

## Drug Levels and Effects

### Summary of Use during Lactation

Marine oils, such as fish oil or algal oil, are a rich source of omega-3 fatty acids, especially the essential fatty acids, docosahexaenoic acid (DHA) and eicosapentaenoic acid (EPA). Algal oil is high in DHA and low in EPA, whereas fish oil has more EPA than DHA. The DHA level in breastmilk is typically between 0.2% and 0.3% in Western countries.[1]

Fish oil up to 3 grams daily is “generally recognized as safe” (GRAS) as a food by the U.S. Food and Drug Administration. Current dietary recommendations for nursing mothers is 250 to 375 mg daily of DHA plus EPA.[2] Lactating women require a daily dosage of about 1 gram DHA plus EPA to reach a milk DHA plus EPA of 1 gram/dL at 4 weeks postpartum. This is usually sufficient to meet the DHA requirements of term breastfed infants, but not the higher requirements of preterm infants, where additional maternal supplementation is needed.[3] Maternal diet determines breastmilk levels of DHA and EPA and supplementation increases them within hours after supplementation, although ongoing milk concentrations depend more on long-term than short-term (past 3-days) intake.[4-8] Higher milk levels result in higher infant plasma and erythrocyte levels of omega-3 fatty acid-derived phospholipid. One study found that breastmilk DHA was a better predictor of infant erythrocyte DHA than direct supplementation of the infants with fish oil.[9] Higher levels of DHA in breastmilk are consistently linked to better motor, cognitive, and behavioral outcomes and a reduced risk of allergic disease in early childhood.[10]

Supplementation with omega-3 fatty acids has been studied for improving various infant outcomes. An international panel of experts concluded that DHA supplementation during breastfeeding is desirable.[11] Several meta-analyses have been performed on fish oil supplementation during breastfeeding.[12-16] The most recent and comprehensive systemic reviews found that maternal supplementation with omega-3-polyunsaturated fatty acids during lactation improved language ability and favorable psychomotor outcomes throughout infancy and later childhood.[15-17] Two meta-analyses found that maternal supplementation with omega-3-polyunsaturated fatty acids during lactation had little or no beneficial effect on childhood allergic diseases.[18,19] Although DHA supplementation increases anti-inflammatory components and reduced inflammatory prostaglandins in milk, supplementation of mothers with preterm infants did not decrease the frequency of bronchopulmonary dysplasia at 36 weeks gestational age.[20,21] Weak evidence for improved vision and attention was found in one study.[12,13] Long-term follow-up of a small group of children whose mothers received fish oil supplements during lactation found that boys had a delayed puberty, shorter average height, and higher systolic blood pressure at age 13 years, but no differences in self-rated socioemotional outcomes or physical activity at 13 years of age.[22,23] Infants breastfed by overweight or obese mothers who took 3 grams of fish oil daily had greater ponderal index and reduced insulin resistance compared to placebo at 3 months of age.[24] Other studies found that maternal fish oil supplementation during pregnancy and lactation reduced oxidative stress in their breastfed infants.[25,26]

Supplementation of nursing mothers with fish oil of about 800 mg of DHA plus EPA for 6 months altered the infant intestinal microbiome in a way that might decrease resistance to colonization with pathogens; however, no increase in infant illnesses were seen.[27] Another study found that supplementing mothers with DHA during the third trimester of pregnancy and for 6 weeks postpartum increased the prevalence of Lactobacillus in the intestinal tracts of the mothers and their breastfed infants.[28] A meta-analysis of 35 randomized, controlled trials found that women with a diagnosis of severe depression obtained benefit from omega-3 fatty acids, but those with mild depression did not.[29] The most common complaint while taking fish oil is burping a fishy taste after ingestion. However, breast milk odor is not changed by maternal fish oil consumption.[30]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Numerous studies have examined the effect of omega-3 fatty acid ingestion during pregnancy and lactation on breastmilk fatty acid composition. Only studies in which supplementation was started postpartum are reviewed below.

Maternal Levels. Five nursing mothers were supplemented with fish oil containing 1080 mg of EPA and 720 mg of DHA daily for 21 days, beginning at 2 weeks postpartum. Milk samples were collected daily before the dose; once weekly, milk samples were also collected at 4, 8, 12 and 16 hours after the dose. On day 21, predose milk levels of DHA (by 89%), EPA (by 525%) and another omega-3 fatty acid (docosapentaenoic acid; by 143%) were significantly increased over their initial levels. Mean and peak levels increased each week during the study on each of the days where sequential levels were measured. Peak omega-3 fatty acid levels occurred 12 hours after ingestion.[31]

New mothers intending to breastfeed for at least 12 weeks were randomized to receive placebo (n = 12) or algal-derived DHA in a dose of 0.2 (n = 10), 0.4 (n = 12), 0.9 (n = 10) or 1.3 (n = 8) grams daily starting at day 5 postpartum. At 12 weeks postpartum, DHA levels in breastmilk were linearly proportional to the dose of DHA ingested, expressed as the following percentages of total breastmilk fatty acids: 0.21% (placebo), 0.35% (0.2 grams), 0.46% (0.4 grams), 0.86% (0.9 grams), and 1.13% (1.3 grams).[32]

Mothers who were breastfeeding at least 75% were randomized to receive supplements of either high-DHA algal oil (n = 6), high-DHA eggs (n = 6), low EPA fish oil (n = 6) or regular eggs (n = 6) beginning at 2 weeks postpartum. Supplementation provided doses of < 230 mg, 170 mg, 260 mg and <35 mg daily of DHA, respectively. After 6 weeks of supplementation, breastmilk DHA was increased in all supplemented groups and correlated with DHA intake. Breastmilk DHA was decreased in the regular egg group.[33]

Ten mothers of preterm infants (<29 weeks gestational age) were given 1200 mg of DHA daily beginning within the first week postpartum and continued for 8 to 12 weeks. A group of 22 mothers who met the same criteria, but without maternal supplementation served as a reference group. The average DHA breastmilk concentration in supplemented mothers increased 5-fold over the baseline value within the first week of supplementation. Breastmilk DHA in the supplemented group was about 12 times higher than in the reference group at 49 days postpartum.[34]

A double-blind study randomized 51 mothers of newborn, term infants to receive normal diet (control), normal diet plus 224 mg daily of DHA from algal oil, or normal diet plus 150 grams of fatty fish 3 times weekly. Supplemented mothers maintained consistent DHA levels in colostrum, transitional and mature milk. Mothers on normal diets had a decrease in DHA from colostrum to mature milk. The amount in mature milk was significantly less than that in the milk of supplemented mothers.[35]

Mothers who donated milk to a milk bank were randomized to receive either single-cell algal oil capsules equivalent to 1 gram of DHA (n = 6), daily or placebo capsules (n = 7). Mothers in both groups had DHA intake lower than recommended at baseline. The DHA content of milk increased in supplemented mothers. The milk of supplemented mothers provided a sufficient amount of DHA for preterm infant, but not the milk of unsupplemented mothers.[36]

Eighty-two nursing mothers who were 4 to 6 weeks postpartum were randomly assigned to take placebo, 200 mg or 800 mg DHA supplements daily each morning with food for 6 weeks. Mothers supplied a mid-nursing breastmilk sample before starting the supplementation and once weekly for 6 weeks. Compared to mothers who received a placebo, breastmilk levels of DHA were 50% higher for mothers who took 200 mg of DHA daily and 123% higher for mothers who took 800 mg DHA daily.[37]

One hundred ten mothers were randomly assigned to receive either a control drink (n = 54) or a drink (n = 56) containing fish oil with 72 mg of EPA and 320 mg/dL of DHA daily in two doses during pregnancy and lactation. Breastmilk samples were obtained at birth (colostrum) and at the first second and fourth month postpartum. The content of DHA and EPA as well as n-3-polyunsaturated fats were higher in the milk of supplemented mothers at all time points.[38]

Ninety-five pregnant women at risk of having an allergic infant were randomized to daily supplements of 2.7 grams of omega-3 fatty acids (EPA 1.6 grams and DHA 1.1 grams) or a placebo from week 25 of pregnancy until 3 months of lactation. Breast milk samples were collected as colostrum, and at one and 3 months postpartum. Omega-3 milk fatty acids were higher in women who received omega-3 supplements than in the placebo group at all time points.[39]

Eight women received a fish- and krill-oil supplement (Krilling D, Italchimici S.P.A., Milan, Italy) in a dose of 250 mg of DHA and 70 mg of EPA daily for 30 days. A control group of 8 women did not receive the supplement. Five of the 8 women who received the active drug had abnormally low intake of DHA than recommended by guidelines at the beginning of the study. Both DHA and EPA milk levels were higher at the end of 30 days in the supplement group than in the control group.[40]

In a randomized, blinded study, mothers of preterm infants were randomized to receive capsules containing 1.2 grams of DHA or placebo daily. On postnatal day 14 the mean percentage of DHA in total fatty acids in expressed breastmilk samples was 0.95% in the DHA group and 0.34% in the placebo group.[21]

A study In Ethiopia randomized nursing mothers to receive either daily fish oil capsules containing 500 mg of long-chain n-3 fatty acids (215 mg DHA + 285 mg EPA--Biover NV, Belgium) or identical capsules containing corn oil. Milk concentrations of DHA were increased by 39% and EPA was increased by 36% at 6 and 12 months after the start of supplementation.[41]

A small cross-sectional analysis of a Japanese milk study cohort found that mothers who took fish oil supplements had higher levels of DHA in their breastmilk (0.74%) than mothers who did not (0.55%).[42]

A manufacturer-sponsored randomized, double-blind study in Germany provided nursing mothers either a supplement (n = 32) containing DHA, lutein and multiple micronutrients (Elevit Breastfeeding and Postnatal Care--Bayer, Basel, Switzerland) or placebo (n = 33) containing only iodine 225 mcg once daily. Supplementation began at 4 to 6 weeks postpartum and lasted about 12 weeks. Milk DHA increased from 0.25% to 0.35% in the treatment group and decreased from 0.26% to 0.21% in the placebo group over the study period.[43]

Milk of mothers of preterm infants (<29 weeks) participating in a clinical study of 1.2 grams daily of DHA from a DHA-rich algae oil during the first week postpartum (n = 196) were compared to milk in the placebo group (n = 193). There was no difference in the average total amount of fatty acids in milk in the supplemented group compared with the placebo group (35.3 grams/L vs 36.7 grams/L), but the average DHA content was higher in the supplemented group than in the placebo group (0.95% vs 0.34%). In addition to increasing DHA content, the algae oil supplementation increased n-6 docosapentaenoic acid content in the DHA group compared to the placebo group (0.27% vs 0.04%). Milk EPA was also 15% higher in the supplemented group than in the placebo group.[44] A sample of women from this trial had their milk content measured at 14 days postpartum. Compared to the placebo group with low DHA levels in milk, there was a reduction in pro-inflammatory prostaglandins (PGF_2_α and PGE_2_) in the supplemented mothers with high DHA milk levels. Ten oxylipins derived from DHA and 18-HEPE (18-hydroxy-eicosapentaenoic acid) were higher in the supplemented mothers with high DHA milk levels than in the placebo group and in supplemented mothers with low DHA levels.[20]

A subsample of 120 women who had received algal DHA 400 mg supplements for the first 6 months of pregnancy had their milk DHA levels measured at 1 day, and at 1 and 6 months postpartum. The mean DHA values in breastmilk were higher in the supplemented group (n = 60) than in the placebo group (n = 60) at all time points.[45]

Infant Levels. Five nursing mothers were supplemented with fish oil containing 1080 mg of EPA and 720 mg of DHA daily for 21 days, beginning at 2 weeks postpartum. The infants’ average erythrocyte content of EPA increased by 636% and docosapentaenoic acid increased by 260% on day 21 compared to baseline. The ratio of omega-6 to omega-3 fatty acids decreased significantly by 22%. DHA content was increased only slightly, but the difference was not statistically significant.[31]

New mothers intending to breastfeed for at least 12 weeks were randomized to receive placebo (n = 12) or algal-derived DHA in a dose of 0.2 (n = 10), 0.4 (n = 12), 0.9 (n = 10) or 1.3 (n = 8) grams daily starting at day 5 postpartum. At 12 weeks, their breastfed infants had blood samples measured for plasma and erythrocyte DHA-derived phospholipid. The DHA-phospholipid levels increased proportionately up to a milk DHA level of about 0.8% of total milk lipids, then reached a plateau where higher milk DHA concentrations did not further increase infant DHA-phospholipid levels. Infant EPA-phospholipid levels also increase slightly, while omega-6 fatty acid phospholipids decreased.[46]

Mothers who were breastfeeding at least 75% were randomized to receive supplements of either high-DHA algal oil (n = 6), high-DHA eggs (n = 6), low EPA fish oil (n = 6) or regular eggs (n = 6) beginning at 2 weeks postpartum. Supplementation provided doses of < 230 mg, 170 mg, 260 mg and <35 mg daily of DHA, respectively. After 6 weeks of supplementation, infant plasma DHA-phospholipid was increased in all supplemented groups, with the highest in the alga oil group. DHA increased only slightly in the regular egg group.[33]

Ten mothers of preterm infants (<29 weeks gestational age) were given 1200 mg of DHA daily beginning within the first week postpartum and continued for 8 to 12 weeks. A group of 22 mothers who met the same criteria, but without maternal supplementation served as a reference group. Infants were exclusively fed their mother’s breastmilk, if possible, but some were partially formula fed. At 49 days of age, the infants whose mothers were given DHA supplementation received an estimated 55 mg/kg daily of DHA and the reference group infants received 7 mg/kg daily of DHA.[34]

Eighty-two nursing mothers who were 4 to 6 weeks postpartum were randomly assigned to take placebo, 200 mg or 800 mg DHA supplements daily each morning with food for 6 weeks. After 6 weeks of supplementation of their mothers, breastfed infants’ plasma DHA increased by 71% and 101% for the infants of low- and high-dose supplements, respectively, compared to the placebo group. The plasma omega 6:3 ratios were lower in the infants of supplemented mothers.[37]

One hundred ten mothers were randomly assigned to receive either a control drink (n = 54) or a drink (n = 56) containing fish oil with 72 mg of EPA and 320 mg/dL of DHA daily in two doses during pregnancy and lactation. Infants were breastfed, but the extent was not stated. At 2.5 months of life, DHA, n-3 and C24:1 −9 polyunsaturated fatty acids were higher in the plasma and erythrocyte membranes of the infants of supplemented mothers. EPA levels were also higher in the plasma of the infants whose mothers were supplemented.[38]

A study In Ethiopia randomized nursing mothers to receive either daily fish oil capsules containing 500 mg of long-chain n-3 fatty acids (215 mg DHA + 285 mg EPA--Biover NV, Belgium) or identical capsules containing corn oil. The capillary blood levels of DHA and EPA in the breastfed infants were correlated with the increases in maternal DHA and EPA.[41]

Twenty-seven lactating women were given a daily supplement containing 200 mg of microalgal DHA beginning at about 5 weeks postpartum. After 10 weeks of supplementation, their median milk fatty acid content of DHA content increased from a baseline of 0.19% to 0.34%. Increases were greater in women with a low baseline DHA content.[47]

### Effects in Breastfed Infants

Ninety-five pregnant women at risk of having an allergic infant were randomized to daily supplements of 2.7 grams of omega-3 fatty acids (EPA 1.6 grams and DHA 1.1 grams) or a placebo from week 25 of pregnancy until 3 months of lactation. Infants of supplemented mothers had fewer allergies than unsupplemented infants, but it is unclear is the results were caused by transfer during pregnancy or during lactation.[39,48]

A small sample of children whose mothers were randomized to receive either fish oil or olive oil during the first 4 months of lactation were examined at 13 years of age. Boys, but not girls, whose mothers received fish oil supplements trended towards short heights, apparently because of a delay in puberty. Boys also had a statistically significantly higher systolic blood pressure by an average of 3.9 mm Hg than girls.[22] Another study of the same cohort found no differences in self-rated socioemotional outcomes or physical activity at 13 years of age.[23]

One study found that supplementation of mothers with fish oil during pregnancy and postpartum lactation decreased plasma hydroperoxides especially in newborn at delivery and at 2.5 months of age, and increased superoxide dismutase and catalase in breastfed infants at 2.5 months of age. All of these changes indicate a decrease in oxidative stress in the infants.[25]

Fifty-two breastfeeding mothers provided milk samples at 3 months postpartum for fatty acid analysis and completed the Infant Behavior Questionnaire. Infants whose mothers’ milk was richer in n-3 PUFAs had lower scores on the negative affectivity domain of the IBQ-R, a component of temperament associated with a risk for internalizing disorders later in life. These associations remained statistically significant after considering covariates, including maternal age, marital status, and infant birth weight. The n-6 PUFAs, n-6/n-3 ratio, and total fat of milk were not associated with infant temperament.[49]

Milk samples from the mothers of 120 breast-fed infants were collected at 42 days and 8 months postpartum in Beijing, China. Breast milk EPA levels at both 42 days and 8 months postpartum were negatively associated with infant distractibility when EPA levels were low, suggesting a beneficial effect of higher EPA in breast milk (i.e., improving infant’s attention) when its levels are below a certain threshold.[50]

A study of breastfed preterm infants (<29 weeks gestational age) whose mothers were randomized to receive 1.2 grams daily of DHA as algal oil or placebo found that there was no difference in the rate of bronchopulmonary dysplasia-free survival at 36 weeks between the groups. However, the study was stopped early because of concern for harm.[34]

In a randomized, blinded study, mothers of breastfed infants born before 29 weeks of gestation were randomized to receive capsules containing 1.2 grams of DHA or placebo daily. DHA supplementation did not significantly improve infants’ bronchopulmonary dysplasia-free survival at 36 weeks’ postmenstrual age.[21]

Mother-infant dyads (n = 27) were enrolled at birth, and mothers were assigned to receive either 200 mg or 1000 mg daily of DHA (Expecta). All infants were born at less than 28 weeks gestation. Milk and plasma samples were analyzed for fatty acids and inflammatory markers. Decreases in inflammatory markers (TNF alpha, IL-12p70 and sRAGE) were observed in infant plasma in the high-dose group and correlated with infant red blood cell DHA levels.[51] A follow-up study on 14 of the women who provided a milk sample at 4 weeks postpartum found differential expression of 409 genes in milk. Five main groups of biological processes were upregulated, including those associated with improved immune regulation and management of oxidative stress. Three main groups of biological processes were downregulated, including one associated with immune dysregulation.[52]

A study randomized study of lactating mothers who delivered before 29 weeks’ gestation were given either 1.2 grams of DHA daily (n = 199 mothers, 234 infants) to achieve >1% of DHA in breast milk or placebo (N = 200 mothers, 223 infants) starting within 72 hours of delivery until 36 weeks postmenstrual age. Infants were assessed at 18 to 22 months postpartum with the Bayley-III cognitive, language, and motor composite scores. DHA did not improve infants neurodevelopmental outcomes at 18 to 22 months of age in breastfed, preterm neonates, but subgroup analyses suggested a potential benefit for language in preterm neonates born before 27 weeks’ gestational age.[53]

A double-blind randomized controlled trial compared 6 grams of fish oil daily (3.55 grams daily of n-3 PUFAs) to olive oil (control) from mid-pregnancy until 3 months postpartum in women who were overweight or obese (BMI 25 kg/sq m. or greater). Most of the mothers exclusively breastfed their infants. Ninety-eight infants of the 128 mothers in the study had body fat measurements at 2 weeks and 3 months postpartum. There were no treatment effects on infant outcomes at 2 weeks, but infants in the fish oil arm had a higher BMI z-score and ponderal index at age 3 months of age. Fish oil supplementation lowered infant triglycerides by 21% at 3 months of age, but it did not affect infant insulin resistance.[24]

Mothers of preterm infants (between 23 0/7 and 28 6/7 weeks’ gestation) were randomized to receive either oral capsules of DHA 1.2 grams daily or placebo capsules within 72 hours of delivery and until their infant reached 36 weeks’ postmenstrual age. In a study subanalysis, 132 children completed neurodevelopmental assessment at 5 years (DHA, N = 64, placebo, N = 68). Total difficulties score did not differ between the DHA and placebo groups nor any of the secondary outcomes. The authors concluded that in very preterm infants, high-dose DHA supplementation did not improve behavioral functioning at 5 years of age.[54]

A small randomized controlled trial compared 100 mg daily DHA supplementation in the third trimester alone (n = 27) to the third trimester and 42 days postpartum (n = 26) and to placebo (n = 26). The mothers supplemented postpartum had higher levels of DHA in colostrum than the other groups, but not in mature milk. At 42 days postpartum, both mothers and infants in the postpartum supplementation group had a higher abundance of the genus Lactobacillus in the fecal microbiome.[28]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Jackson KH, Harris WS. Should there be a target level of docosahexaenoic acid in breast milk? Curr Opin Clin Nutr Metab Care 2016;19:92-6.26751734
2 US Department of Health and Human Services and US Department of Agriculture. Dietary Guidelines for Americans 2015-2020. [Eighth Edition]. 2015. https://health.gov/dietaryguidelines/2015/guidelines/
3 Koletzko B. Should women providing milk to their preterm infants take docosahexaenoic acid supplements? Clin Perinatol 2017;44:85-93.28159211
4 Amaral YN, Marano D, Silva LM, . Are there changes in the fatty acid profile of breast milk with supplementation of omega-3 sources? A systematic review. Rev Bras Ginecol Obstet 2017;39:128-41.28315281
5 Bzikowska-Jura A, Czerwonogrodzka-Senczyna A, Jasinska-Melon E, . The concentration of omega-3 fatty acids in human milk is related to their habitual but not current intake. Nutrients 2019;11:1585.31336991
6 Yang Y, Li GY, Li F, . Impact of DHA from algal oil on the breast milk DHA levels of lactating women: A randomized controlled trial in China. Nutrients 2022;14:3410.36014916
7 He Y, Chen L, Miao M, . Maternal n-3 fatty acid supplementation has an immediate impact on the human milk fatty acid composition. Food Funct 2024;15:11630-9.39523804
8 Munhoz J, Wattar N, Goruk S, . Determinants of maternal and infant omega-3 status at 3 months postpartum: Findings from the APrON longitudinal cohort study. Am J Clin Nutr 2025;121:629-42.39788297
9 Meldrum SJ, D’Vaz N, Casadio Y, . Determinants of DHA levels in early infancy: Differential effects of breast milk and direct fish oil supplementation. Prostaglandins Leukot Essent Fatty Acids 2012;86:233-9.22572105
10 Valle-Valdez B, Terrazas-Lopez X, Gonzalez-Rocha A, . Dietary patterns of docosahexaenoic acid intake and supplementation from pregnancy through childhood with a focus on low- and middle-income countries: A narrative review of implications for child health. Nutrients 2025;17:3931.41470876
11 Cetin I, Devlieger R, Isolauri E, . International expert consensus on micronutrient supplement use during the early life course. BMC Pregnancy Childbirth 2025;25:44.39833730
12 Delgado-Noguera MF, Calvache JA, Bonfill Cosp, X, . Supplementation with long chain polyunsaturated fatty acids (LCPUFA) to breastfeeding mothers for improving child growth and development. Cochrane Database Syst Rev 2015;7:CD007901.
13 Lehner A, Staub K, Aldakak L, . Impact of omega-3 fatty acid DHA and EPA supplementation in pregnant or breast-feeding women on cognitive performance of children: Systematic review and meta-analysis. Nutr Rev 2021;79:585-98.32918470
14 Quin C, Erland BM, Loeppky JL, . Omega-3 polyunsaturated fatty acid supplementation during the pre and post-natal period: A meta-analysis and systematic review of randomized and semi-randomized controlled trials. J Nutr Intermediary Metab 2016;5:34-54. doi:10.1016/j.jnim.2016.04.005
15 Nevins JEH, Donovan SM, Snetselaar L, . Omega-3 fatty acid dietary supplements consumed during pregnancy and lactation and child neurodevelopment: A systematic review. J Nutr 2021;151:3483-94.34383914
16 Liu Y, Zhong L, Sun Z, . N-3 fatty acid supplementation in mothers and infants for childhood psychomotor and cognitive development: An updated systematic review and meta-analysis. Matern Child Nutr 2025;21:e13767.39609259
17 Huber L, Ventura EF, Ensenauer R, . Human milk bioactive compounds and psychomotor outcomes in infants and children: A systematic review. Mol Nutr Food Res 2026;70:e70553.42487557
18 Klemens CM, Berman DR, Mozurkewich EL. The effect of perinatal omega-3 fatty acid supplementation on inflammatory markers and allergic diseases: A systematic review. BJOG 2011;118:916-25.21658192
19 Gunaratne AW, Makrides M, Collins CT. Maternal prenatal and/or postnatal n-3 long chain polyunsaturated fatty acids (LCPUFA) supplementation for preventing allergies in early childhood. Cochrane Database Syst Rev 2015;7:CD010085.
20 Fougère H, Greffard K, Guillot M, . Docosahexaenoic acid-rich algae oil supplementation in mothers of preterm infants is associated with a modification in breast milk oxylipins profile. Lipids in health and disease 2023;22:103.37452341
21 Marc I, Piedboeuf B, Lacaze-Masmonteil T, . Effect of maternal docosahexaenoic acid supplementation on bronchopulmonary dysplasia-free survival in breastfed preterm infants: A randomized clinical trial. Jama 2020;324:157-67.32662862
22 Lauritzen L, Eriksen SE, Hjorth MF, . Maternal fish oil supplementation during lactation is associated with reduced height at 13 years of age and higher blood pressure in boys only. Br J Nutr 2016;116:2082-90.28065179
23 Lauritzen L, Hegelund ER, Eriksen SE, . Effect of maternal fish oil supplementation during lactation on socioemotional wellbeing and physical activity in 13-year-old children: A randomized clinical trial. Prostaglandins Leukot Essent Fatty Acids 2023;197:102588 37689008
24 Satokar VV, Derraik JGB, Harwood M, . Fish oil supplementation during pregnancy and postpartum in mothers with overweight and obesity to improve body composition and metabolic health during infancy: A double-blind randomized controlled trial. Am J Clin Nutr 2023;117:883-95.36781129
25 Kajarabille N, Hurtado JA, Peña-Quintana L, . Omega-3 LCPUFA supplement: A nutritional strategy to prevent maternal and neonatal oxidative stress. Matern Child Nutr 2017;13:e12300.27072591
26 Sahin ON, Ozpinar A, Serdar M. Maternal omega-3 polyunsaturated fatty acids supplementation in pregnancy decreases MMP-1 levels in breastmilk: a cross-sectional study. J Matern Fetal Neonatal Med 2022;35:3143-51.32962453
27 Quin C, Vollman DM, Ghosh S, . Fish oil supplementation reduces maternal defensive inflammation and predicts a gut bacteriome with reduced immune priming capacity in infants. ISME J 2020;14:2090-104.32398661
28 He T, Zhang J, Zhao A, . Docosahexaenoic acid supplementation in pregnancy and early lactation: Impacts on breast milk docosahexaenoic acid and maternal-Infant gut microbiota - a randomized controlled trial. Clin Nutr 2025;54:71-82.41045839
29 Appleton KM, Rogers PJ, Ness AR. Updated systematic review and meta-analysis of the effects of n-3 long-chain polyunsaturated fatty acids on depressed mood. Am J Clin Nutr 2010;91:757-70.20130098
30 Sandgruber S, Much D, Amann-Gassner U, . Sensory and molecular characterisation of human milk odour profiles after maternal fish oil supplementation during pregnancy and breastfeeding. Food Chem 2011;128:485-94.25212160
31 Henderson RA, Jensen RG, Lammi-Keefe CJ, . Effect of fish oil on the fatty acid composition of human milk and maternal and infant erythrocytes. Lipids 1992;27:863-9.1491604
32 Makrides M, Neumann MA, Gibson RA. Effect of maternal docosahexaenoic acid (DHA) supplementation on breast milk composition. Eur J Clin Nutr 1996;50:352-7.8793415
33 Jensen CL, Maude M, Anderson RE, . Effect of docosahexaenoic acid supplementation of lactating women on the fatty acid composition of breast milk lipids and maternal and infant plasma phospholipids. Am J Clin Nutr 2000;71 (1 Suppl):292S-9S.10617985
34 Marc I, Plourde M, Lucas M, . Early docosahexaenoic acid supplementation of mothers during lactation leads to high plasma concentrations in very preterm infants. J Nutr 2011;141:231-6.21169226
35 Scopesi F, Calevo MG, Risso FM, . The impact of a DHA enriched diet on breast milk composition. Early Hum Dev 2011;87 (Suppl.):S96. doi:10.1016/j.earlhumdev.2010.12.038
36 Valentine CJ, Morrow G, Pennell M, . Randomized controlled trial of docosahexaenoic acid supplementation in midwestern US human milk donors. Breastfeed Med 2013;8:86-91.22568471
37 Sherry CL, Oliver JS, Marriage BJ. Docosahexaenoic acid supplementation in lactating women increases breast milk and plasma docosahexaenoic acid concentrations and alters infant omega 6:3 fatty acid ratio. Prostaglandins Leukot Essent Fatty Acids 2015;95:63-9.25701002
38 Hurtado JA, Iznaola C, Peña M, . Effects of maternal omega-3 supplementation on fatty acids and on visual and cognitive development: A randomized trial. J Pediatr Gastroenterol Nutr 2015;61:472-80.25988553
39 Warstedt K, Furuhjelm C, Falth-Magnusson K, . High levels of omega-3 fatty acids in milk from omega-3 fatty acid supplemented mothers are related to less immunoglobulin E-associated disease in infancy. Acta Paediatr 2016;105:1337-47.26970335
40 Cimatti AG, Martini S, Munarini A, . Maternal supplementation with krill oil during breastfeeding and long-chain polyunsaturated fatty acids (LCPUFAs) composition of human milk: A feasibility study. Front Pediatr 2018;6:407.30622936
41 Argaw A, Bouckaert KP, Wondafrash M, . Effect of fish-oil supplementation on breastmilk long-chain polyunsaturated fatty acid concentration: A randomized controlled trial in rural Ethiopia. Eur J Clin Nutr 2021;75:809-16.33159163
42 Bentele-Jaberg N, Guenova E, Mehra T, . The phytotherapeutic fenugreek as trigger of toxic epidermal necrolysis. Dermatology 2015;231:99-102.26138328
43 Schaefer E, Demmelmair H, Horak J, . Multiple micronutrients, lutein, and docosahexaenoic acid supplementation during lactation: A randomized controlled trial. Nutrients 2020;12:3849.33339438
44 Fougère H, Bilodeau JF, Lavoie PM, . Docosahexaenoic acid-rich algae oil supplementation on breast milk fatty acid profile of mothers who delivered prematurely: A randomized clinical trial. Sci Rep 2021;11:21492.34728723
45 Khandelwal S, Kondal D, Gupta R, . Docosahexaenoic acid supplementation in lactating women increases breast milk and erythrocyte membrane docosahexaenoic acid concentrations and alters infant n-6:n-3 fatty acid ratio. Curr Dev Nutr 2023;7:102010.37877035
46 Gibson RA, Neumann MA, Makrides M. Effect of increasing breast milk docosahexaenoic acid on plasma and erythrocyte phospholipid fatty acids and neural indices of exclusively breast fed infants. Eur J Clin Nutr 1997;51:578-84.9306083
47 Jackson KH, Klatt KC, Caudill MA, . Baseline red blood cell and breast milk DHA levels affect responses to standard dose of DHA in lactating women on a controlled feeding diet. Prostaglandins Leukot Essent Fatty Acids 2021;166:102248.33516092
48 Barman M. Effect of maternal supplementation with fish oil during pregnancy and lactation on allergy development in childhood. Acta Paediatr 2016;105:1348.27381168
49 Hahn-Holbrook J, Fish A, Glynn LM. Human milk omega-3 fatty acid composition is associated with infant temperament. Nutrients 2019;11:2964 31817237
50 Jia K, Feng Y, Brenna JT, . Breast milk EPA associated with infant distractibility when EPA level is low. Nutrition 2021;86:111143.33601118
51 Valentine CJ, Dingess KA, Kleiman J, . A randomized trial of maternal docosahexaenoic acid supplementation to reduce inflammation in extremely preterm infants. J Pediatr Gastroenterol Nutr 2019;69:388-92.31058771
52 Adams JM, Valentine CJ, Karns RA, . DHA supplementation attenuates inflammation-associated gene expression in the mammary gland of lactating mothers who deliver preterm. J Nutr 2022;152:1404-14.35199834
53 Guillot M, Synnes A, Pronovost E, . Maternal high-dose DHA supplementation and neurodevelopment at 18-22 months of preterm children. Pediatrics 2022;150:e2021055819.35652296
54 Paquet SP, Pronovost E, Simonyan D, . Maternal high-dose docosahexaenoic acid supplementation and neurodevelopment at 5 years of preterm children. Clin Nutr ESPEN 2024;64:253-62.39396702

## Substance Identification

### Substance Name

Marine Oils

### CAS Registry Number

8016-13-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Oils

Phytotherapy

Plants, Medicinal